# Oil of Lemon Eucalyptus

CASRN: 42822-86-6

## Drug Levels and Effects

### Summary of Use during Lactation

No published information is available on the clinical use of oil of lemon eucalyptus (para-menthanediol) during breastfeeding. However, the Centers for Disease Control and Prevention and U.S. Environmental Protection Agency consider oil of lemon eucalyptus to be safe and effective during breastfeeding when used as directed. It should be used by breastfeeding women to avoid exposure to mosquito-borne viruses. [1] Avoid application directly to the nipple and other areas where the infant might directly ingest the product.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Diethyltoluamide, Icaridin, Insect Repellent M 3535

### References

1 Centers for Disease Control and Prevention. Avoid bug bites. Accessed 5/20/2021. http://wwwnc.cdc.gov/travel/page/avoid-bug-bites#repellent

## Substance Identification

### Substance Name

Oil of Lemon Eucalyptus

### CAS Registry Number

42822-86-6

### Drug Class

Breast Feeding

Lactation

Insect Repellents

Plant Extracts